# Cetirizine

CASRN: 83881-51-0

## Drug Levels and Effects

### Summary of Use during Lactation

Small occasional doses of cetirizine are acceptable during breastfeeding. Larger doses or more prolonged use may cause drowsiness and other effects in the infant or decrease the milk supply, particularly in combination with a sympathomimetic such as pseudoephedrine or before lactation is well established. International guidelines recommend cetirizine as an acceptable choice if an antihistamine is required during breastfeeding.[1,2] Cetirizine has been used successfully in cases of persistent pain of the breast during breastfeeding.[3]

Ophthalmic use of cetirizine by the mother should pose little risk to the breastfed infant. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Three women who were exclusively breastfeeding their 5- to 6-month-old infants were taking cetirizine 10 mg daily by mouth. Each mother donated milk samples before a dose and 1, 2, 4, 6, 8, 10, 12 and 24 hours after the dose. An average peak level of 49 mcg/L occurred at an average of 2 hours after the dose. The average milk concentration over the 24-hour period was 21.1 mcg/L. An exclusively breastfed infant would receive an average of 3.1 mcg/kg daily or a weight-adjusted dosage of 1.77% of the maternal dosage.[4]

As part of a validation study on analysis of cetirizine and levocetirizine in breastmilk, 252 steady-state milk samples from 228 women taking either cetirizine 5 to 20 mg daily (n = 229) or levocetirizine 5 mg daily (n = 9) were analyzed. Specific dosages and times of milk collection were not given. The median milk concentrations of cetirizine and levocetirizine was 13 mcg/L (range 0.65 to 65 mcg/L; IQR 4.9 to 24.8 mcg/L) in 228 samples. Twenty-four samples had levels below the limit of quantification (<0.39 mcg/L).[5]

Women taking cetirizine (n = 31) collected complete sample of milk at about 0, 2, 4, 8, 12 and 24 hours after a daily dose and submitted aliquots for analysis. The average milk concentration was 16.8 mcg/L and the half-life in milk was 7 hours. The peak milk concentration averaged 41 mcg/L at an average time of 2.4 hours after a dose. Using the peak milk concentration, the authors calculated that a fully breastfed infant would receive a maximum of 2.5 mcg/kg daily, which represents a relative infant dose of 1.9%.[6] The authors used the data in this study to create a pharmacokinetic model using NONMEM. The model predicted an average RID of 1.8% and a worst-case RID of 3.4% using peak milk levels.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one telephone follow-up study, mothers reported irritability and colicky symptoms 10% of infants exposed to various antihistamines and drowsiness was reported in 1.6% of infants. None of the reactions required medical attention.[8]

A woman who was nursing (extent not stated) her newborn infant was treated for pemphigus with oral prednisolone 25 mg daily, with the dosage increased over 2 weeks to 60 mg daily. She was also taking cetirizine 10 mg daily and topical betamethasone 0.1% twice daily to the lesions. Because of a poor response, the betamethasone was changed to clobetasol propionate ointment 0.05%. She continued breastfeeding throughout treatment and her infant was developing normally at 8 weeks of age and beyond.[9]

A woman with narcolepsy took sodium oxybate 4 grams each night at 10 pm and 2 am as well as fluoxetine 20 mg and cetirizine 5 mg daily throughout pregnancy and postpartum. She breastfed her infant except for 4 hours after the 10 pm oxybate dose and 4 hours after the 2 am dose. She either pumped breastmilk or breastfed her infant just before each dose of oxybate. The infant was exclusively breastfed or breastmilk fed for 6 months when solids were introduced. The infant was evaluated at 2, 4 and 6 months with the Ages and Stages Questionnaires, which were withing the normal range as were the infant's growth and pediatrician's clinical impressions regarding the infant's growth and development.[10]

Three women taking long-term cetirizine 10 mg daily by mouth while exclusively breastfeeding their 5- to 6-month old infants. The mothers reported no adverse effects in their infants.[4]

Thirty-one women taking cetirizine 10 mg (n = 29) or 20 mg (n = 2) daily reported no adverse effects in 61% of their infants and minor adverse effects fever, sedation, rash, poor feeding, bruising, refusing of the breast or constipation. But mothers attributed these effects to other causes such a cold, weaning or learning to crawl.[6]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[11,12] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[11] Whether lower oral doses of cetirizine have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a study of 31 women taking cetirizine 10 mg (n = 29) or 20 mg (n = 2) daily, 10 reported a perceived decrease in milk supply over the prior 3 days.[6]

### Alternate Drugs to Consider

Desloratadine, Fexofenadine, Levocetirizine, Loratadine

### References

1 Powell R, Du T, GL, Siddique N, et al. BSACI guidelines for the management of chronic urticaria and angio-oedema. Clin Exp Allergy 2007;37:631-50.17456211
2 Middleton P, Gade E, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
3 Muddana A, Asbill D, Jerath M, et al. Quantitative sensory testing, antihistamines, and beta-blockers for management of persistent breast pain: A case series. Breastfeed Med 2018;13:275-80.29630399
4 Wilkerson H, Datta P, Rewers-Felkins K, et al. Maternal transfer of cetirizine into human milk. J Hum Lact 2021;37:135-8.32853084
5 Wegler C, Saleh A, Lindqvist A, et al. Simple and rapid quantification of cetirizine, venlafaxine, and O-desmethylvenlafaxine in human breast milk, and metformin in human milk and plasma with UHPLC-MS/MS. J Chromatogr B Analyt Technol Biomed Life Sci 2022;1205:123340.35732105
6 Nordeng H, Wegler C, Lindqvist A, et al. Transfer of cetirizine/levocetirizine into human breast milk and estimation of drug exposure to infants through breastfeeding - a human lactation study from the ConcePTION project. Basic Clin Pharmacol Toxicol 2024;134:153-64.37811726
7 Melander E, Nielsen E, Lindqvist A, et al. Population pharmacokinetic modelling of cetirizine concentrations in human breast milk-A contribution from the ConcePTION project. Basic Clin Pharmacol Toxicol 2025;136:e14100.39497323
8 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
9 Westermann L, Hugel R, Meier M, et al. Glucocorticosteroid-resistant pemphigoid gestationis: Successful treatment with adjuvant immunoadsorption. J Dermatol 2012;39:168-71.22379622
10 Gashlin L, Sullo D, Lawrence R, et al. Treatment of narcolepsy with sodium oxybate while breastfeeding: A case report. Breastfeed Med 2016;11:261-3.27057786
11 Messinis I, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
12 Pontiroli A, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996

## Substance Identification

### Substance Name

Cetirizine

### CAS Registry Number

83881-51-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines